# Naloxegol

CASRN: 854601-70-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the excretion of naloxegol into breastmilk. Because of the possibility of inducing opioid withdrawal in the breastfed infant, the manufacturer states that breastfeeding is not recommended during treatment with naloxegol. If it is used, observe breastfed infants who have been exposed to opioids during pregnancy or postpartum for signs of opioid withdrawal, especially diarrhea. An alternate drug may be preferable.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Methylnaltrexone, Naldemedine

## Substance Identification

### Substance Name

Naloxegol

### CAS Registry Number

854601-70-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Gastrointestinal Agents

Narcotic Antagonists